# Bitter Orange

## Drug Levels and Effects

### Summary of Use during Lactation

Bitter orange (Citrus aurantium) fruit contains several adrenergic agonists, primarily p-synephrine, but also octopamine and tyramine, as well as numerous flavonoids. Bitter orange has no specific lactation-related uses, but high dosages are often used in weight-loss agents. No data exist on the excretion of any components of bitter orange into breastmilk or on the safety and efficacy of bitter orange in nursing mothers or infants. Bitter orange is "generally recognized as safe" (GRAS) as a food and flavoring by the U.S. Food and Drug Administration. High dosages of bitter orange are often combined with caffeine and other stimulants in weight loss products, and the combinations may cause cardiac stimulation. Because of the lack of information on high dosages used in supplements and because animal data indicate that the adrenergic agents in bitter orange might decrease milk production, it should probably be avoided by nursing mothers, especially while nursing a newborn or preterm infant.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information in humans was not found as of the revision date. However, animal data indicate that octopamine decreases prolactin and might decrease milk production.[1] Pseudoephedrine, a pharmacologically similar vasoconstrictor, decreases milk production in nursing mothers after oral use.[2]

### References

1 Becú-Villalobos D, Thyssen SM, Rey EB, et al. (1992). Octopamine and phenylethylamine inhibit prolactin secretion both in vivo and in vitro. Proc Soc Exp Biol Med.
2 Aljazaf K, Hale TW, Ilett KF, et al. (2003). Pseudoephedrine: effects on milk production in women and estimation of infant exposure via breastmilk. Br J Clin Pharmacol.

## Substance Identification

### Substance Name

Bitter Orange

### Scientific Name

Citrus aurantium

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Food

Phytotherapy

Plants, Medicinal